# Thiotepa

CASRN: 52-24-4

## Drug Levels and Effects

### Summary of Use during Lactation

Most sources consider breastfeeding to be contraindicated during maternal antineoplastic drug therapy, especially alkylating agents such as thiotepa.[1] Labeling suggests that mothers should not breastfeed during therapy and for 1 week after the last dose of thiotepa. Chemotherapy may adversely affect the normal microbiome and chemical makeup of breastmilk.[2] Women who receive chemotherapy during pregnancy are more likely to have difficulty nursing their infant.[1]

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Pistilli B, Bellettini G, Giovannetti E, et al. Chemotherapy, targeted agents, antiemetics and growth-factors in human milk: How should we counsel cancer patients about breastfeeding? Cancer Treat Rev 2013;39:207-11 23199900
2 Urbaniak C, McMillan A, Angelini M, et al. Effect of chemotherapy on the microbiota and metabolome of human milk, a case report. Microbiome 2014;2:24 25061513

## Substance Identification

### Substance Name

Thiotepa

### CAS Registry Number

52-24-4

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antineoplastic Agents, Alkylating

Myeloablative Agonists